# Verapamil

CASRN: 52-53-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of verapamil up to 360 mg daily produce low levels in milk. Newborns may have detectable verapamil serum levels, but levels are low. Verapamil would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months.

### Drug Levels

Maternal Levels. The first 2 cases of verapamil excretion in milk found disparate results.[1,2] In one, milk levels ranging from 19 to 38 mcg/L were found at various times during a dosing regimen of 80 mg orally 3 times daily in a mother who was 3 to 5 days postpartum. Milk levels averaged 23% of serum levels.[2] In the second woman who was 13 days postpartum, milk levels peaked at about 300 mcg/L about 1 hour after each 80 mg dose in a 80 mg 4 times daily regimen and were approximately equal to serum levels at most times.[1]

In 2 later cases (below), plasma and milk verapamil and norverapamil levels were measured using more accurate methods. The results reported in these 2 papers were consistent with each other and differed from both of the earlier studies in some aspects.[3,4]

A woman who was 8 weeks postpartum and taking 120 mg of verapamil orally every 8 hours had milk verapamil levels of 113 and 154 mcg/L of verapamil just before a dose, with the higher level occurring later in the feeding, probably because of the higher fat content. At 4 hours after a dose, levels were 133 and 205 mcg/L early and late in the feeding, respectively. Norverapamil levels were similar early and late in each feeding and averaged 50 mcg/L before the dose and 58 mcg/L at 4 hours. The authors estimated that a nursing infant would receive less than 0.5% of the mother’s weight-adjusted dosage.[3]

A 3-month-postpartum woman taking verapamil 80 mg orally three times daily had peak milk levels of verapamil of 79 mcg/L 1 hour after the dose and norverapamil of 22 mcg/L 2 hours after the dose. The authors estimated that a nursing infant would receive less than 0.01% of the mother’s weight-adjusted dose daily.[4]

A study of a new analytic technique found verapamil concentration in the breastmilk of one nursing mother taking verapamil 80 mg daily to range from 1.8 to 10.73 mcg/L, and norverapamil to range from 2.15 to 5.15 mcg/L. The peak concentrations of the two drugs occurred at about 4 hours after the dose. The authors estimated the RID to be about 0.15%.[5]

Infant Levels. A serum level of 2.1 mcg/L was reported in a 5-day-old infant whose mother was taking 80 mg of verapamil orally 3 times daily. It is possible that some of the drug in the infant’s serum derived from transplacental passage, although the mother received no verapamil on the day of delivery.[2]

Two older infants (8 weeks and 3 months) had no detectable serum verapamil or norverapamil (<1 mcg/L) with oral maternal doses of 80 and 120 mg 3 times daily.[3,4]

### Effects in Breastfed Infants

No adverse reactions have been reported among 3 infants aged 13 days, 8 weeks and 3 months who were exposed to verapamil in breastmilk.[2–4]

### Effects on Lactation and Breastmilk

Verapamil can cause hyperprolactinemia and galactorrhea.[6,7] The clinical relevance of these findings in nursing mothers is not known. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Calcium Channel Blockers) Diltiazem, Nifedipine; (Hypertension) Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Inoue H, Unno N, Ou MC, . Level of verapamil in human milk. Eur J Clin Pharmacol 1984;26:657–8.6468488
2 Andersen HJ. Excretion of verapamil in human milk. Eur J Clin Pharmacol 1983;25:279–80.6628513
3 Miller MR, Withers R, Bhamra R, . Verapamil and breast-feeding. Eur J Clin Pharmacol 1986;30:125–6.3709626
4 Anderson P, Bondesson U, Mattiasson I, . Verapamil and norverapamil in plasma and breast milk during breast feeding. Eur J Clin Pharmacol 1987;31:625–7.3830249
5 Bai M, Wu Y, Zhang S, . Simultaneous determination of verapamil and norverapamil concentrations in human breast Milk by LC-MS/MS. Chinese Pharmaceutical Journal 2025;60:1064–70. doi:10.11669/cpj.2025.10.009
6 Fearrington EL, Rand CH, Jr, Rose JD. Hyperprolactinemia-galactorrhea induced by verapamil. Am J Cardiol 1983;51:1466–7.6682619
7 Gluskin LE, Strasberg B, Shah JH. Verapamil-induced hyperprolactinemia and galactorrhea. Ann Intern Med 1981;95:66–7.7195677

## Substance Identification

### Substance Name

Verapamil

### CAS Registry Number

52-53-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Calcium Channel Blockers

Antiarrhythmics

Vasodilator Agents